# Acoramidis

CASRN: 1446711-81-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of acoramidis during breastfeeding. If a mother requires acoramidis, it is not a reason to discontinue breastfeeding. Until more data become available, acoramidis should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Monitor the breastfed infant for gastrointestinal adverse reactions, such as diarrhea.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Acoramidis

### CAS Registry Number

1446711-81-4

### Drug Class

Breast Feeding

Lactation

Milk, Human